# Probenecid

CASRN: 57-66-9

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of probenecid up to 2 grams daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. In animal studies, probenecid increased the breastmilk excretion of cimetidine, possible via an interaction with an active transport mechanism in the breast.[1] The implications of enhanced excretion of drugs given with probenecid for nursing mothers and their infants has not been studied; however, only a few drugs are known to undergo active transport into breastmilk.

### Drug Levels

Maternal Levels. A woman was given probenecid 500 mg orally 4 times daily to enhance cephalexin serum levels. After 16 days of therapy at 4.5 weeks postpartum, 12 samples of breastmilk (6 pairs of fore- and hindmilk) were collected over a 16-hour period. The average concentration of probenecid in milk was 964 mcg/L, corresponding to an infant dosage of 145 mcg/kg daily and 0.7% of the maternal weight-adjusted dosage.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with mastitis received 3 days of intravenous cephalothin, followed by 16 days of probenecid 500 mg and cephalexin 500 mg 4 times daily for 16 days. Her infant developed green liquid stools, severe diarrhea, discomfort and crying. The authors judged the effects to be probably related to the cephalothin and cephalexin in milk rather than the probenecid.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Gerk PM, Oo CY, Paxton EW, et al. (2001). Interactions between cimetidine, nitrofurantoin, and probenecid active transport into rat milk. J Pharmacol Exp Ther.
2 Ilett KF, Hackett LP, Ingle B, et al. (2006). Transfer of probenecid and cephalexin into breast milk. Ann Pharmacother.

## Substance Identification

### Substance Name

Probenecid

### CAS Registry Number

57-66-9

### Drug Class

Breast Feeding

Lactation

Antigout Agents

Gout Suppressants

Sulfonamides

Uricosuric Agents